# Raltegravir

CASRN: 518048-05-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of up to 1200 mg daily of raltegravir produce low levels in milk and infant serum and would not be expected to cause any adverse effects in breastfed infants. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2]

### Drug Levels

Maternal Levels. A woman infected with HIV was receiving raltegravir 800 mg, emtricitabine 200 mg and tenofovir disoproxil 245 mg once daily. She exclusively breastfed her infant for 4 months, then partially until 9 months postpartum. Breastmilk samples were taken over 12- to 24-hour periods at 4 and 8 months postpartum. At 4 months postpartum, the average milk concentration over 12 hours was 0.66 mg/L with an estimated daily infant dose of 0.099 mg/kg or 0.8% of the approved daily raltegravir dosage for infants. At 8 months postpartum, a peak milk level of about 6 mg/L occurred at about 6 hours after the dose. The level fell to about 0.3 mg/L at 24 hours after the dose.[3]

Milk samples were obtained from 10 mothers taking raltegravir either 400 mg twice daily or 1200 mg once daily. Three milk samples were obtained from others taking 400 mg twice daily at a median of 3.6 hours after a dose. The median drug concentration in milk was 1635 mcg/L, which resulted in an estimated infant dosage of 0.25 mg/kg daily and a relative infant dose of 4.1% of the maternal weight-adjusted dosage. Mothers taking raltegravir 1200 mg once daily provided 14 milk samples at a median of 13.7 hours after a dose. The median drug concentration in milk was 111 mcg/L, which resulted in an estimated infant dosage of 20 mcg/kg daily and a relative infant dose of 0.28% of the maternal weight-adjusted dosage.[4]

In a retrospective study in a German hospital of mothers who were receiving antiretroviral prophylaxis, one mother was receiving raltegravir 400 mg twice daily. Breastmilk levels obtained at unspecified times with respect to the dose were 1757 mcg/L at 14 days postpartum, 293 mcg/L at 1 month postpartum and 168 mcg/L at 4 months postpartum.[5]

Infant Levels. A woman infected with HIV was receiving raltegravir 800 mg, emtricitabine 200 mg and tenofovir disoproxil 245 mg once daily. She exclusively breastfed her infant for 4 months, then partially until 9 months postpartum. Single blood samples taken from the infant at 4 hours after a maternal dose at 4 and 8 months postpartum were below the lower limit of quantification (0.01 mg/L) of the assay.[3]

An infant was breastfed by a mother taking raltegravir 400 mg twice daily, although the extent of breastfeeding was not sated. The infant’s serum concentrations taken 2 hours after maternal drug intake at 1 month of age was 21 mcg/L. Another 6 infants were breastfed by mothers taking raltegravir 1200 mg once daily, although the extent of breastfeeding was not sated. Infant serum concentrations taken between 11 and 19 hours after maternal drug intake at 1 month of age were undetectable in 5 infants and 14 mcg/L in one.[4]

In a retrospective study in a German hospital, one mother who was receiving raltegravir 400 mg twice daily exclusively breastfed her infant. Infant serum concentrations obtained at unspecified times at 2 weeks and 1 and 4 months of age were all <75 mcg/L.[5]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lamivudine, Nelfinavir, Nevirapine, Zidovudine

### References

1 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
2 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
3 Feiterna-Sperling C, Bukkems VE, Teulen MJA, et al. Low raltegravir transfer into the breastmilk of a woman living with HIV. Aids 2020;34:1863–5.32675580
4 Aebi-Popp K, Kahlert CR, Crisinel PA, et al. Transfer of antiretroviral drugs into breastmilk: A prospective study from the Swiss Mother and Child HIV Cohort Study. J Antimicrob Chemother 2022;77:3436–42.36177836
5 Spielberger BD, Zink A, Rohr JC, et al. Breastfeeding on ART and a closer look at drug transfer to HIV-exposed uninfected infants. Sci Rep 2025;15:32612.40968165

## Substance Identification

### Substance Name

Raltegravir

### CAS Registry Number

518048-05-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

HIV Integrase Inhibitors